# Ifosfamide

CASRN: 3778-73-2

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially alkylating agents such as ifosfamide.[1] Labeling suggests that mothers should not breastfeed during therapy and for 1 week after the last dose of ifosfamide or mesna. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Urbaniak C, McMillan A, Angelini M, et al. (2014). Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome.

## Substance Identification

### Substance Name

Ifosfamide

### CAS Registry Number

3778-73-2

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Alkylating Agents